# Mechlorethamine

CASRN: 51-75-2

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider that mothers receiving antineoplastic therapy should not breastfeed, especially with alkylating agents such as mechlorethamine.[1] Because of the potential for serious adverse reactions in the breastfed infant, breastfeeding from mechlorethamine mothers should not breastfed during therapy with mechlorethamine therapy, including topical application.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. (2013). Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding?. Cancer Treat Rev.

## Substance Identification

### Substance Name

Mechlorethamine

### CAS Registry Number

51-75-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Alkylating Agents

Irritants